# Zonisamide

CASRN: 68291-97-4

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of zonisamide up to 400 mg daily produce high levels in milk and infant serum. Infant serum levels in neonates decrease to below the therapeutic range after 3 days and continue to decrease during the first month of life while continuing nursing. Although no adverse reactions have been reported in breastfed infants, the number of infants reported have been small. Alternative drugs are preferred, but if it must be given, monitor the infant for drowsiness, adequate weight gain, and developmental milestones, especially in younger or exclusively breastfed infants and when using combinations of anticonvulsant drugs. Some clinicians recommend that mothers taking zonisamide only partially breastfeed in order to reduce the exposure of the infant to the drug and to consider monitoring infants’ serum zonisamide concentrations.[1]

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. A woman took zonisamide monotherapy (dosage and regimen not specified) during pregnancy and postpartum. Two serum concentrations were measured: 13.6 mg/L at 3 hours before delivery and 23.2 mg/L on day 17 postpartum. Milk samples were collected postpartum and measured for zonisamide using untreated breastmilk in an enzyme immunoassay. Milk levels were 4.6 mg/L at 58 hours postpartum, 13.6 at 61 hours postpartum, and 19.2 mg/L at 77 hours postpartum.[2]

A mother was taking oral zonisamide 300 mg daily. Milk levels measured 1.5 hours after her dose on days 6 and 30 postpartum were 9.75 and 10.5 mg/L, respectively. Milk levels measured 2.5 hours after her dose on days 3 and 15 postpartum were 8.25 and 9.12 mg/L, respectively.[3] The same authors reported that “patients” (number and time postpartum unspecified) taking oral zonisamide 300 mg daily had an average (+/− SD) breastmilk level of 9.41 +/− 0.95 mg/L.[4] These values are exactly the same as the average and standard deviation of the former patient’s 4 milk levels. It is likely that these results are merely a duplicate of the above results.

A mother who was taking oral zonisamide 400 mg, carbamazepine 1 g, and clonazepam 1 mg daily had breastmilk whey levels of zonisamide measured 9 times from day 1 to day 10 postpartum. All of the levels were distributed (neither increasing nor decreasing) in the range of 8.9 to 10.9 mg/L.[5]

Using data from the 2 patients with relatively complete information on dosage and milk levels,[2,4] the average amounts in milk represent an infant dosage of about 23 to 28% of the maternal weight-adjusted dosage.

In one report, two mothers took zonisamide during pregnancy and breastfeeding. One mother was taking 300 mg (6.2 mg/kg) zonisamide daily as 100 mg in the morning and 200 mg in the evening. On days 4 and 5 postpartum, milk zonisamide levels were 16.2 mg/L at 10 hours after a 100 mg dose and 18 mg/L at 12.5 hours after a 200 mg dose. Using the larger value, the authors estimated the maximum infant dosage to be 2.7 mg/kg daily corresponding to 44% of the weight-adjusted maternal dosage. Another woman was taking 100 mg (2.1 mg/kg) of zonisamide daily. On day 3 postpartum, a trough milk level was 3.4 mg/L; on day 5, a level taken at 4.5 hours after the dose (approximately the peak) was 5.1 mg/L. Using the larger value, the authors estimated the maximum infant dosage to be 0.77 mg/kg daily corresponding to 36% of the weight-adjusted maternal dosage.[1]

Two breastfeeding women who were taking zonisamide had zonisamide levels measured in their milk. One woman who was taking a dose of 500 mg daily and levetiracetam had milk levels of 15.2, 13.2 and 11.3 mg/L at 3, 7 and 12 days postpartum, respectively, after one pregnancy. After a subsequent pregnancy, when she was taking a dose of 550 mg daily and levetiracetam she had a milk level of 13.3 mg/L at 3 days postpartum. The second woman was taking zonisamide 400 mg daily had a milk level of 10.3 mg/L at 3 days postpartum.[6]

A physiologically based pharmacokinetic model of zonisamide predicted an RID of 30 to 33 % in neonates, which is similar to prior case reports. After 3 days postpartum, the infant serum levels fall to below the minimum of the therapeutic range.[7]

Infant Levels. The serum zonisamide levels were measured in a breastfed infant whose mother was taking zonisamide 400 mg, carbamazepine 1 g, and clonazepam 1 mg daily. In this infant and in another breastfed infant whose mother was taking zonisamide 400 mg and carbamazepine 800 mg daily, high transplacentally acquired plasma levels of about 14 and 11 mg/L, respectively, fell over a 6- to 7-day monitoring period despite intake via breastmilk. The first infant’s plasma level on day 24 was 3.9 mg/L.[5]

An infant whose mother was taking zonisamide (dose not specified) during pregnancy and breastfeeding had a serum zonisamide concentration that was 3.6 mg/L or 17% of the maternal serum concentration at 9 days postpartum. The half-life of zonisamide in this infant and one other was estimated to be about 100 hours.[8]

An infant whose mother was taking zonisamide 300 mg (6.2 mg/kg) daily was exclusively breastfed for 9 days postpartum, then breastfed twice daily and supplemented with formula 7 to 8 times daily, resulting in an estimated zonisamide dose of 0.54 mg/kg daily or 8% of the maternal weight-adjusted dosage. At birth, the infant’s serum zonisamide concentration was 14.4 mg/L, but on day 34 postpartum, zonisamide was undetectable (<0.5 mg/L) in the infant’s serum.[1]

In a multicenter study of nursing mother-infant pairs, 4 infants had blood samples taken at about the same time as maternal blood samples. Two of the infants had blood levels of zonisamide above the lower limit of quantification (1 mg/L). The authors estimated the average infant zonisamide serum concentration to be 6.5 mg/L (range 3.9 to 18.7 mg/L), assuming unquantifiable serum concentrations to be 50% of the lower limit of quantification. Median infant blood levels were 44.2% (range 35.2 to 125.3%) of their mothers’ blood levels.[9]

A breastfeeding woman who was taking zonisamide had zonisamide levels measured in both her and her infants’ serum in two pregnancies. While taking a dose of 500 mg daily and levetiracetam, her infant had serum levels of 13.1, 7.3 and 6.4 mg/L at 2, 6 and 12 days postpartum, respectively. The infant-to-maternal serum concentration ratio 0.44 at 12 days postpartum. After a subsequent pregnancy, the same mother was taking a dose of 550 mg daily plus levetiracetam and the second infant had a serum level of 13.9 mg/L at 4 days postpartum.[6]

### Effects in Breastfed Infants

A patient taking zonisamide 300 mg orally 3 times daily as well as other unspecified antipsychotics was followed at 0, 3, 14 and 30 days postpartum. Her infant exhibited no behavioral problems.[3]

Two infants were breastfed postpartum by their mothers. One was exclusively breastfed for 9 days postpartum, then breastfed twice daily and supplemented with formula 7 to 8 times daily. The maternal zonisamide dose was 300 mg (6.2 mg/kg) daily. On day 34, the infant was healthy, had gained weight and had experienced no observable adverse effects. The second infant was partially breastfed by a mother taking zonisamide 100 mg (2.1 mg/kg) daily. No adverse reactions were noted in the infant during the first 2 weeks postpartum, at which time breastfeeding was discontinued because of a low milk supply.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Ando H, Matsubara S, Oi A, . Two nursing mothers treated with zonisamide: Should breast-feeding be avoided? J Obstet Gynaecol Res 2014;40:275–8.24033821
2 Kimura S. Zonisamide: Its placental transport, biological half-life in the newborn, and transport into mother’s milk--a study of a case of an infant born of a mother who had been treated with zonisamide alone during pregnancy. No To Hattatsu 1998;30:350–1.9734979
3 Shimoyama R, Ohkubo T, Sugawara K. Monitoring of zonisamide in human breast milk and maternal plasma by solid-phase extraction HPLC method. Biomed Chromatogr 1999;13:370–2.10425030
4 Sugawara K, Shimoyama R, Ohkubo T. Determinations of psychotropic drugs and antiepileptic drugs by high-performance liquid chromatography and its monitoring in human breast milk. Hirosaki Med J 1999;51 Suppl:S81–6.
5 Kawada K, Itoh S, Kusaka T, . Pharmacokinetics of zonisamide in perinatal period. Brain Dev 2002;24:95–7.11891100
6 Kacirova I, Urinovska R, Grundmann M. Therapeutic monitoring of lacosamide, perampanel, and zonisamide during breastfeeding. Epilepsy Res 2024;199:107264.38041996
7 Li Y, Liu Z, Chen Y, . Physiologically based pharmacokinetic coupled model of zonisamide to predict the exposure and dose exploration in maternal, fetal, and neonatal populations during pregnancy and postpartum. J Pharm Sci 2025;114:103912.40712827
8 Öhman I, Tomson T. Pharmacokinetics of zonizamide in neonatal period and during lactation. Basic Clin Pharmacol Toxicol 2011;109 (Suppl 1):73. doi:10.1111/j.1742-7843.2011.00722.x 21332946
9 Birnbaum AK, Meador KJ, Karanam A, . Antiepileptic drug exposure in infants of breastfeeding mothers with epilepsy. JAMA Neurol 2020;77:441–50.31886825

## Substance Identification

### Substance Name

Zonisamide

### CAS Registry Number

68291-97-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants